# Cinacalcet

CASRN: 226256-56-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on cinacalcet during breastfeeding. However, several newborn infants with disorders of calcium metabolism have been safely treated with cinacalcet.[1,2] Cinacalcet levels in milk are unlikely to be as high as the doses used in these case. If cinacalcet is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, cinacalcet should only be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Leunbach TL, Hansen AT, Madsen M, et al. A novel case of neonatal severe hyperparathyroidism successfully treated with a type II calcimimetic drug. Bone Rep 2021;14:100761.33748353
2 Karagöz K, Küçükali GK, Kavurt AS, et al. Experience with cinacalcet in neonatal severe hyperparathyroidism due to CASR mutation. Horm Res Paediatr 2024;97:282. doi:10.1159/000541189

## Substance Identification

### Substance Name

Cinacalcet

### CAS Registry Number

226256-56-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Calcium-Regulating Hormones and Agents

Calcimimetic Agents